# Guanabenz

CASRN: 5051-62-7

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of guanabenz during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Candesartan, Benazepril, Captopril, Enalapril, Lisinopril, Quinapril, Hydrochlorothiazide, Methyldopa, Propranolol

## Substance Identification

### Substance Name

Guanabenz

### CAS Registry Number

5051-62-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Adrenergic alpha-2 Receptor Agonists